# Methylphenidate

CASRN: 113-45-1

## Drug Levels and Effects

### Summary of Use during Lactation

In dosages prescribed for medical indications, limited evidence indicates that methylphenidate levels in milk are very low and not detectable in infant serum. If methylphenidate is required by the mother, it is not a reason to discontinue breastfeeding.[1] It is possible that large dosages of methylphenidate might interfere with milk production, especially in women whose lactation is not well established.

### Drug Levels

Maternal Levels. Three mothers were taking methylphenidate in an average dosage of 52 mg daily (range 35 to 80 mg daily) for attention deficit hyperactivity disorder. The average milk level was 19 mcg/L which resulted in an infant dosage of 2.9 mcg/kg daily or 0.7% of the maternal weight-adjusted dosage.[2]

The same authors reported a nursing mother who was taking methylphenidate, but it is unclear if this patient is one of those reported above. The mother was taking 40 mg twice daily, 5 days/week for 5.5 weeks prior to testing, but for 7 consecutive days immediately before collecting blood and milk samples after a morning dose of 40 mg. The average milk level of methylphenidate over the 24 hours after the dose was 15.4 mcg/L. The infant was calculated to receive 2.3 mcg/kg daily which was 0.2% of the maternal weight-adjusted dosage.[3]

A woman who was 11 months postpartum was taking oral immediate-release methylphenidate 5 mg in the morning and 10 mg at noon. The drug was undetectable (<0.3 mcg/L) before the morning dose and 21 hours after the noon dose. Three other levels ranged from1.7 to 3.8 mcg/L. The authors estimated that a fully breastfed infant would receive a dose of 0.38 mcg/kg daily or 0.16% of the maternal weight-adjusted dosage.[4]

A woman was taking 72 mg daily of slow-release methylphenidate. The drug was undetectable (assay limit not stated) in breastmilk at 6 to 12 months postpartum.[5]

A partially nursing mother was taking extended-release methylphenidate (Concerta) 36 mg daily and duloxetine 90 mg daily for ADHD, generalized anxiety disorder, borderline personality disorder, and depression. On day 29, a milk sample was taken 6.5 hours after her doses. The methylphenidate concentration in milk was 7.9 mcg/L with an estimated relative infant dosage of 0.2%, assuming milk intake of 150 mL/kg daily.[6]

Infant Levels. Methylphenidate plasma levels were measured in 2 breastfed infants. These were 2 of 3 infants whose mothers were taking an average of 52 mg daily of methylphenidate. The drug was undetectable (<1 mcg/L) in the infants’ plasma; however, the corresponding maternal dosages and times of blood collection were not stated in the abstract.[2]

A 6.4-month-old partially breastfed infant had been breastfed for 5.5 weeks by a mother taking methylphenidate 40 mg twice daily. The drug was undetectable (<1 mcg/L) in the infant’s plasma 5.3 hours after the mother’s dose and having been breastfed 4 times since the dose.[3] This patient might have been one of those in the report above by the same authors.

An infant was born to a mother with attention deficit-hyperactivity disorder who took a tapering dose of methylphenidate before and during pregnancy. The drug was stopped 10 days prior to delivery, but restarted after 5 weeks postpartum. Methylphenidate was undetectable (assay limit not stated) in the infant’s blood between 6 and 2 months of age when the mother was taking a dose of 72 mg of slow-release methylphenidate daily. The extent of breastfeeding was not stated.[5]

### Effects in Breastfed Infants

Seven of 8 infants, whose mothers were taking either dextroamphetamine (average dosage 25 mg daily) or methylphenidate (average dosage 52 mg daily) were clinically evaluated. The infants had no drug-related adverse reactions and were developing normally for their ages which averaged 4.4 months.[2]

One 6.4-month-old infant was mostly breastfed by a mother who had been taking methylphenidate 40 mg twice daily 5 days/week for 5.5 weeks. The mother reported that the infant was sleeping, eating and gaining weight normally.[3] This patient might have been one of those in the report above by the same authors.

An infant was being breastfed (extent not stated) by a mother who began taking sertraline 50 mg daily and methylphenidate after 5 weeks postpartum. The dosage began at 10 mg daily with an immediate-release product and gradually increased to 72 mg daily of an extended-release product. At 14 weeks of age, the infant was developing normally with no feeding difficulties. Examinations at 6 months and 1 year of age found no developmental problems in the child.[5]

A nursing mother was taking extended-release methylphenidate (Concerta) 36 mg daily and duloxetine 90 mg daily for ADHD, generalized anxiety disorder, borderline personality disorder, and depression. She partially (amount not stated) breastfed her infant for about 1 month. At 6 months of age, the infant’s development was considered to be normal, except for recurrent pneumonia caused by congenital pulmonary airway malformation.[6]

A woman with narcolepsy discontinued methylphenidate during pregnancy, but continued sertraline 100 mg and a prenatal vitamin daily during pregnancy and postpartum. She expressed breastmilk for bottle feeding and her infant was fed breastmilk exclusively until 6 months of age, and was weaned at 7 months. When her infant was 13 weeks old, she resumed methylphenidate 10 mg three times daily. The infant met all growth milestones through 6 months of age.[7]

A woman who was taking extended-release bupropion 300 mg daily for depression was diagnosed with attention deficit/hyperactivity disorder. She started on immediate-release methylphenidate 5 mg daily which was increased to 5 mg twice daily by 2 months postpartum. At 3 months postpartum, she transitioned to an osmotically controlled-release formulation of methylphenidate oral tablet, beginning at 18 mg daily, which was subsequently increased to 27 mg daily at 4 months and then to 36 mg daily at 6 months postpartum. Her exclusively breastfed infant maintained normal growth and developmental milestones during the first 6.75 months of life.[8]

### Effects on Lactation and Breastmilk

Methylphenidate reduces serum prolactin,[9] but no studies have been located as of the revision date on the effect of methylphenidate on milk production. The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

A 15-year-old girl had been receiving methylphenidate 54 mg daily in an osmotic release tablet (OROS) for 2 years. Sertraline was started for depression at 50 mg daily and increased to 100 mg daily along with haloperidol 0.5 mg daily. After 12 weeks of therapy, inattentiveness at school and headaches prompted a change from the OROS product to a modified-release methylphenidate product (brand not specified) at 30 mg daily, then increasing to 50 mg daily. Three days after the increase in dosage, the girl had spontaneous milk flow from both breasts and subsequently had an elevated serum prolactin of 67.7 mcg/L. Methylphenidate and haloperidol were discontinued, but sertraline was continued. One week later, galactorrhea resolved completely. Fifteen days after drug discontinuation, the girl’s prolactin level was in the normal range at 19.4 mcg/L.[10]

### Alternate Drugs to Consider

(ADHD) Amphetamine, Dextroamphetamine, Lisdexamfetamine (Narcolepsy) Amphetamine, Armodafinil, Dextroamphetamine, Lisdexamfetamine, Modafinil, Oxybate Salts, Pitolisant

### References

1 Ornoy A. Pharmacological treatment of attention deficit hyperactivity disorder during pregnancy and lactation. Pharm Res 2018;35:46.29411149
2 Hackett LP, Ilett KF, Kristensen JH, . Infant dose and safety of breastfeeding for dexamphetamine and methylphenidate in mothers with attention deficit hyperactivity disorder. Ther Drug Monit 2005;27:220–1. doi:10.1097/00007691-200504000-00056
3 Hackett LP, Kristensen JH, Hale TW, . Methylphenidate and breast-feeding. Ann Pharmacother 2006;40:1890–1.16940409
4 Spigset O, Brede WR, Zahlsen K. Excretion of methylphenidate in breast milk. Am J Psychiatry 2007;164:348.
5 Bolea-Alamanac BM, Green A, Verma G, . Methylphenidate use in pregnancy and lactation: A systematic review of evidence. Br J Clin Pharmacol 2014;77:96–101.23593966
6 Collin-Lévesque L, El-Ghaddaf Y, Genest M, . Infant exposure to methylphenidate and duloxetine during lactation: A case report. Breastfeed Med 2018;13:221–5.29485905
7 Bello G, Poirier J, Sharkey KM. Successful lactation after resuming methylphenidate in a woman with narcolepsy. J Clin Sleep Med 2022;18:1891–4.35404225
8 Kim J, Nichols DA, Zhang T, . Managing attention-deficit/hyperactivity disorder in a breastfeeding mother: A case report. Pharmacotherapy 2025;45:529–34.40536085
9 Upadhyaya HP, Brady KT, Liao J, . Neuroendocrine and behavioral responses to dopaminergic agonists in adolescents with alcohol abuse. Psychopharmacology (Berl) 2003;166:95–101.12520313
10 Ekinci O, Gunes S, Ekinci N. Galactorrhea probably related with switching from osmotic-release oral system methylphenidate (MPH) to modified-release MPH: An adolescent case. Clin Psychopharmacol Neurosci 2017;15:282–4.28783939

## Substance Identification

### Substance Name

Methylphenidate

### CAS Registry Number

113-45-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adrenergic Agents

Central Nervous System Stimulants

Dopamine Agents

Sympathomimetics

Wakefulness-Promoting Agents